# Pantoprazole

CASRN: 102625-70-7

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal pantoprazole doses of 40 mg daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. A mother who was 10 months postpartum and partially nursing her infant was given a single 40 mg dose of oral pantoprazole. Pantoprazole was detectable in milk only 2 and 4 hours after the dose with milk levels of 36 mcg/L and 24 mcg/L, respectively, at those times. It was not detectable (<10 mcg/L) in milk at 6, 8 and 24 hours after the dose. The authors estimated that a fully breastfed infant would receive 0.14% of the maternal weight-adjusted dosage.[1]

Sixteen lactating, but not breastfeeding, women were given oral pantoprazole 40 mg daily for one week. Breastmilk samples were obtained at baseline and 1.5, 3, 4.5, and 6 h following the dose on days 1 and 7. Of 149 breastmilk samples, only 26 had detectable (>0.03 mg/L) pantoprazole concentrations. Peak milk concentrations typically occurred at 3 hours after the dose on day 7. Using the average peak milk concentration, the estimated worst-case infant daily dosage via milk was approximately 0.011 mg/kg. This represents a conservative estimate, as peak milk concentrations are not sustained over the full 24-hour dosing interval.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A retrospective claims database study in the United States found that users of proton pump inhibitors had an increased risk of gynecomastia.[3]

A review article reported that a search of database from the European Pharmacovigilance Centre found 48 cases of gynecomastia, 3 cases of galactorrhea, 14 cases of breast pain and 4 cases of breast enlargement associated with pantoprazole. A search of the WHO global pharmacovigilance database found 97 cases of gynecomastia, 13 cases of galactorrhea, 35 cases of breast pain and 16 cases of breast enlargement associated with pantoprazole.[4]

### Alternate Drugs to Consider

Antacids, Cimetidine, Famotidine, Omeprazole, Sucralfate

### References

1 Plante L, Ferron GM, Unruh M, et al. Excretion of pantoprazole in human breast milk. J Reprod Med 2004;49:825–7.15568407
2 Bor S, Ergun P, Sahin S, et al. Maternal PPI therapy during lactation: Pantoprazole levels in human milk and possible neonatal implications. Eur J Pediatr 2026;185 41840063
3 He B, Carleton B, Etminan M. Risk of gynecomastia with users of proton pump inhibitors. Pharmacotherapy 2019;39:614–8.30865318
4 Ashfaq M, Haroon MZ, Alkahraman YM. Proton pump inhibitors therapy and risk of hyperprolactinemia with associated sexual disorders. Endocr Regul 2022;56:134–47.35489049

## Substance Identification

### Substance Name

Pantoprazole

### CAS Registry Number

102625-70-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Ulcer Agents

Gastrointestinal Agents

Proton Pump Inhibitors